# Palopegteriparatide

CASRN: 2222514-07-8

## Drug Levels and Effects

### Summary of Use during Lactation

Palopegteriparatide is a prodrug of teriparatide and should have similar concerns during breastfeeding. One infant with congenital hyperparathyroidism was breastfed during maternal use of teriparatide. The infant appeared to be protected against hypoparathyroidism by breastfeeding. If palopegteriparatide is used in a nursing mother, monitor breastfed infants for signs and symptoms of hypercalcemia or hypocalcemia. Serum calcium monitoring should also be considered. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with autosomal dominant hypoparathyroidism type 1 (ADH1) was treated with teriparatide 28 mcg daily by continuous infusion during pregnancy. She also took vitamin D3 1000 IU daily, magnesium oxide 400 mg twice daily, and calcium carbonate 0 to 3 grams orally depending on serum calcium. The infusion was continued for 8 months postpartum in doses ranging from 27 to 30 mcg daily when calcitriol 0.5 mcg twice daily was substituted. She breastfed her infant exclusively for 6 months then with supplementation to 1 year. Her infant had no change in serum calcium when maternal calcitriol was begun. The mother began weaning at 11 months and at 1 year of age when weaning was complete, her infant developed hypocalcemia and was diagnosed with ADH1 and the same genetic mutation as her mother and other family members. Serum parathyroid hormone-related protein levels in the infant were in the mid-normal range during the first year while nursing. A single sample drawn after weaning showed her level had dropped markedly. The breastfed infant appeared to be protected from severe hypocalcemia during the first year of life by the mother’s breastmilk. Growth and development were normal at 1.5 years of age.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Parathyroid Hormone

### References

1 Shulman D. Subcutaneous infusion of rhPTH(1-34) during pregnancy and nursing in a woman with autosomal dominant hypoparathyroidism 1. J Endocr Soc 2022;6:bvac031.35350394

## Substance Identification

### Substance Name

Palopegteriparatide

### CAS Registry Number

2222514-07-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Parathyroid Hormone

Calcium-Regulating Hormones and Agents

Bone Density Conservation Agents